# Riociguat

CASRN: 625115-55-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of riociguat during breastfeeding. Because riociguat is 95% bound to plasma proteins, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be avoided during riociguat use. The drug should be absent from breastmilk 3 days after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Riociguat

### CAS Registry Number

625115-55-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Enzyme Activators

Vasodilator Agents